# Daridorexant

CASRN: 1505484-82-1

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of daridorexant in milk are very low. If daridorexant is required by the mother, it is not a reason to discontinue breastfeeding. Until more data in breastfed infants are available, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Three major metabolites of daridorexant with much lower affinity to orexin receptors than the parent drug have been identified in plasma, but they do not appear to contribute to the pharmacological effect of daridorexant.[1]

Maternal Levels. In a manufacturer-sponsored study, 10 healthy women who were at least 2 weeks postpartum were given a single 50 mg oral dose of daridorexant. Milk was collected either every 4 or 8 hours for 3 days. The peak daridorexant milk level of 35.3 mcg/L occurred 2 hours after the dose. The metabolites M1, M3 and M10 had peak milk levels of 5.61 mcg/L, 9.1 mcg/L and 3.7 mcg/L, respectively. Peak levels of M3 and M10 occurred at 2 hours after the dose, while the peak level of M1 occurred at 6 hours after the dose. The mean daridorexant milk concentration was 6.3 mcg/L and its half-life was 7 hours. It was estimated that 9 mcg of daridorexant was excreted into milk in the first 24 hours after a dose and 10 mcg over 72 hours. The mean absolute infant dose of daridorexant was 0.0016 mg/kg daily and the relative infant dose was 0.22% in the first 24 hours and 0.25% over 72 hours.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Kaufmann P, Muehlan C, Anliker-Ort M, et al. Transfer of the dual orexin receptor antagonist daridorexant into breast milk of healthy lactating women. J Clin Pharmacol 2024;64:1278–87.38736033

## Substance Identification

### Substance Name

Daridorexant

### CAS Registry Number

1505484-82-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Orexin Receptor Antagonists

Sleep Aids, Pharmaceutical